# Antipyrine

CASRN: 60-80-0

## Drug Levels and Effects

### Summary of Use during Lactation

Antipyrine is considered unlikely to harm the infant.[1] Because antipyrine is available in the US only in ear drops, it is unlikely to be absorbed by the mother and reach the breastmilk. No special precautions are required during maternal use of antipyrine-containing ear drops.

### Drug Levels

Maternal Levels. Antipyrine was given to 7 lactating women who were 2 to 19 months postpartum. Each woman drank a single oral dose of 18 mg/kg of antipyrine in solution. Peak milk levels usually occurred 10 minutes after ingestion and ranged from about 10 to 30 mg/L. The antipyrine half-life in milk averaged 11.6 hours (range 5.7 to 21.7 hours). The authors estimated that a fully breastfed infant would ingest 6.4 mg of antipyrine after this maternal dose or 0.59% of the maternal dose (not weight-adjusted). Two of the women who were studied before and after pregnancy indicated that antipyrine clearance might be increased by about two-fold during lactation.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Berlin CM, Jr, Vesell S. Antipyrine disposition in milk and saliva of lactating women. Clin Pharmacol Ther 1982;31:38–44.7053302

## Substance Identification

### Substance Name

Antipyrine

### CAS Registry Number

60-80-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Inflammatory Agents, Non-Steroidal